# Zoledronic Acid

CASRN: 118072-93-8

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of zoledronic acid during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. However, absorption of zoledronic acid by a breastfed infant is unlikely.

### Drug Levels

Zoledronic acid has a serum half-life of about 1.7 hours and is poorly absorbed orally, so absorption of zoledronic acid by a breastfed infant is unlikely.

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Pamidronate

## Substance Identification

### Substance Name

Zoledronic Acid

### CAS Registry Number

118072-93-8

### Drug Class

- Breast Feeding
- Lactation
- Bisphosphonates
- Bone Density Conservation Agents
- Diphosphonates